# Polycarbophil

CASRN: 9003-97-8

## Drug Levels and Effects

### Summary of Use during Lactation

No published experience exists with polycarbophil calcium during breastfeeding. However, the drug is not absorbed from the gastrointestinal tract, so it cannot enter the breastmilk. No special precautions are required.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Constipation) Bisacodyl, Docusate, Magnesium Hydroxide, Psyllium, Sodium Phosphate

## Substance Identification

### Substance Name

Polycarbophil

### CAS Registry Number

9003-97-8

### Drug Class

- Breastfeeding
- Lactation
- Gastrointestinal Agents
- Antidiarrheals
- Laxatives